# Cefaclor

CASRN: 53994-73-3

## Drug Levels and Effects

### Summary of Use during Lactation

Cefaclor is no longer marketed in the United States. Limited information indicates that maternal cefaclor produces low levels in milk which are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefaclor is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. A single dose of cefaclor 250 mg was given orally to 2 nursing mothers. In one mother it was undetectable in milk. In the other, levels of 0.15 to 0.19 mg/L occurred 2 to 4 hours after the dose; by 5 hours it was undetectable. In 5 mothers who received a single 500 mg oral dose, an average peak level of 0.21 mg/L occurred 4 hours after the dose. In individual patients, peak levels of 0.18 to 0.35 mg/L occurred 2 to 5 hours after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 5 nursing mothers reported taking cefaclor (dosage unspecified). One mother reported diarrhea in her infant. No rashes or candidiasis were reported among the exposed infants.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Takase Z, Shirafuji H, Uchida M. Clinical and laboratory studies of cefaclor in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1979;27 (Suppl 7):666-72.
2 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Cefaclor

### CAS Registry Number

53994-73-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins